# Dyphylline

CASRN: 479-18-5

## Drug Levels and Effects

### Summary of Use during Lactation

Dyphylline is no longer marketed in the US. Because of the relatively high levels in milk and a previous report with theophylline, occasional stimulant effects in infants should be anticipated in breastfed infants. No severe adverse reactions are expected. Amounts in milk can be minimized by avoiding breastfeeding for 3 to 4 hours after a dose.

### Drug Levels

Maternal Levels. After intramuscular administration of a single 5 mg/kg dose of dyphylline, peak milk levels usually occurred between 2 and 4 hours after the dose in 20 subjects. Peak milk levels averaged 24.3 mg/L.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Albuterol, Aminophylline, Theophylline

### References

1 Jarboe CH, Cook LN, Malesic I, et al. Dyphylline elimination kinetics in lactating women: Blood to milk transfer. J Clin Pharmacol 1981;21:405-10.7309903

## Substance Identification

### Substance Name

Dyphylline

### CAS Registry Number

479-18-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Bronchodilator Agents